# Levocetirizine

CASRN: 130018-77-8

## Drug Levels and Effects

### Summary of Use during Lactation

Levocetirizine is the R-enantiomer of cetirizine. Based on limited information from cetirizine and levocetirizine, levocetirizine appears to be acceptable during breastfeeding.[1,2] Larger doses or more prolonged use may cause drowsiness and other effects in the infant or decrease the milk supply, particularly in combination with a sympathomimetic such as pseudoephedrine or before lactation is well established. International guidelines recommend cetirizine, the racemic form of the drug, as an acceptable choice if an antihistamine is required during breastfeeding.[3,4]

### Drug Levels

Maternal Levels. As part of a validation study on analysis of cetirizine and levocetirizine in breastmilk, 252 steady-state milk samples from 228 women taking either cetirizine 5 to 20 mg daily (n = 229) or levocetirizine 5 mg daily (n = 9) were analyzed. Specific dosages and times of milk collection were not given. The median milk concentrations of cetirizine and levocetirizine was 13 mcg/L (range 0.65 to 65 mcg/L; IQR 4.9 to 24.8 mcg/L) in 228 samples. Twenty-four samples had levels below the limit of quantification (<0.39 mcg/L).[2]

A woman taking levocetirizine collected complete samples of milk at about 0, 2, 4, 8, 12 and 24 hours after a daily dose and submitted aliquots for analysis. The peak milk levocetirizine concentration was 19.3 mcg/L and the average concentration was 7.2 mcg/L. The peak time was 1.9 hours and half-life was 6.2 hours. Using the peak milk level, the infant daily dosage was calculated to be 1.1 mcg/kg, and the relative infant dosage was 1.9%. These values were consistent with those obtained from 31 women in the same study who were taking cetirizine.[5] Using the average concentration would result in a daily infant dosage of 0.4 mcg/kg daily and a relative infant dosage of 0.7%. The authors used the data in this study to create a pharmacokinetic model using NONMEM. The model predicted an average RID of 1.8% and a worst-case RID of 3.4% using peak milk levels.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information on levocetirizine was not found as of the revision date. In one telephone follow-up study, mothers reported irritability and colicky symptoms in 10% of infants exposed to various antihistamines, and drowsiness was reported in 1.6% of infants. None of the reactions required medical attention.[7]

A nursing mother taking levocetirizine 5 mg daily reported no adverse effects in her breastfed infant.[5]

### Effects on Lactation and Breastmilk

Antihistamines in relatively high doses given by injection can decrease basal serum prolactin in nonlactating women and in early postpartum women.[8,9] However, suckling-induced prolactin secretion is not affected by antihistamine pretreatment of postpartum mothers.[3] Whether lower oral doses of levocetirizine have the same effect on serum prolactin or whether the effects on prolactin have any consequences on breastfeeding success have not been studied. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Cetirizine, Desloratadine, Fexofenadine, Loratadine

### References

1 Wilkerson H, Datta P, Rewers-Felkins K, et al. Maternal transfer of cetirizine into human milk. J Hum Lact 2021;37:135-8.32853084
2 Wegler C, Saleh A, Lindqvist A, et al. Simple and rapid quantification of cetirizine, venlafaxine, and O-desmethylvenlafaxine in human breast milk, and metformin in human milk and plasma with UHPLC-MS/MS. J Chromatogr B Analyt Technol Biomed Life Sci 2022;1205:123340.35732105
3 Powell R, Du T, GL, Siddique N, et al. BSACI guidelines for the management of chronic urticaria and angio-oedema. Clin Exp Allergy 2007;37:631-50.17456211
4 Middleton P, Gade E, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
5 Nordeng H, Wegler C, Lindqvist A, et al. Transfer of cetirizine/levocetirizine into human breast milk and estimation of drug exposure to infants through breastfeeding - a human lactation study from the ConcePTION project. Basic Clin Pharmacol Toxicol 2024;134:153-64.37811726
6 Melander E, Nielsen E, Lindqvist A, et al. Population pharmacokinetic modelling of cetirizine concentrations in human breast milk-A contribution from the ConcePTION project. Basic Clin Pharmacol Toxicol 2025;136:e14100.39497323
7 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
8 Messinis I, Souvatzoglou A, Fais N, et al. Histamine H1 receptor participation in the control of prolactin secretion in postpartum. J Endocrinol Invest 1985;8:143-6.3928731
9 Pontiroli A, De Castro e Silva E, Mazzoleni F, et al. The effect of histamine and H1 and H2 receptors on prolactin and luteinizing hormone release in humans: Sex differences and the role of stress. J Clin Endocrinol Metab 1981;52:924-8.7228996

## Substance Identification

### Substance Name

Levocetirizine

### CAS Registry Number

130018-77-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihistamines